# Mavorixafor

CASRN: 558447-26-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of mavorixafor during breastfeeding. The manufacturer recommends not breastfeeding treatment and for three weeks after the final dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Mavorixafor

### CAS Registry Number

558447-26-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

CXCR4 Receptor Antagonists